# Etrasimod

CASRN: 1206123-37-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of etrasimod during breastfeeding. Etrasimod is 98% bound to plasma proteins and unlikely to reach the breastmilk in large amounts, but it has a slow clearance and long half-life and is potentially toxic to the breastfed infant. Some guidelines recommend avoiding etrasimod while breastfeeding because of the lack of information;[1] however, the manufacturer's labeling does not recommend against the use of etrasimod in breastfeeding. Until more data become available, etrasimod should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mahadevan U, Seow CH, Barnes EL, et al. Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1–S60.40874901

## Substance Identification

### Substance Name

Etrasimod

### CAS Registry Number

1206123-37-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Agents

Sphingosine 1 Phosphate Receptor Modulators